# Glucomannan

CASRN: 76081-94-2

## Drug Levels and Effects

### Summary of Use during Lactation

Glucomannan is a soluble, highly viscous fiber commonly derived from Amorphophallus konjac root. Glucomannan has no specific lactation-related uses. It is most often used to lower cholesterol, to treat constipation and diabetes, and is contained in products to promote weight loss. No data exist on the safety and efficacy of glucomannan in nursing mothers or infants. However, because glucomannan is not absorbable, it will not reach the breastmilk and is very unlikely to affect the nursing infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Glucomannan

### Scientific Name

Amorphophallus konjac

### CAS Registry Number

76081-94-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal